# Dasiglucagon

CASRN: 1544300-84-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of dasiglucagon during breastfeeding. Because dasiglucagon is a large protein molecule with a molecular weight of 3382 Da, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract. No special precautions are required.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Dasiglucagon

### CAS Registry Number

1544300-84-6

### Drug Class

Breast Feeding

Lactation

Gastrointestinal Agents

Hormones